# Fenofibrate

CASRN: 49562-28-9

## Drug Levels and Effects

### Summary of Use during Lactation

No relevant published information exists on the use of fenofibrate during breastfeeding. Because of a concern with disruption of infant lipid metabolism, fenofibrate is best avoided during breastfeeding. An alternate drug is preferred, especially while nursing a newborn or preterm infant. The manufacturer recommends that breastfeeding be avoided during fenofibrate therapy and for 5 days after the final dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Cholestyramine, Colesevelam, Colestipol

## Substance Identification

### Substance Name

Fenofibrate

### CAS Registry Number

49562-28-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticholesteremic Agents

Hypolipidemic Agents

Fibric Acids